# Rizatriptan

CASRN: 144034-80-0

## Drug Levels and Effects

### Summary of Use during Lactation

Breastmilk levels of rizatriptan are low and the half-life in milk is relatively short. Amounts ingested by the infant are small and unlikely to affect the nursing infant. Painful, burning nipples and breast pain have been reported after doses of sumatriptan and other triptans. This has occasionally been accompanied by a decrease in milk production.

### Drug Levels

Maternal Levels. Five women who were at least 1 month postpartum and used rizatriptan to treat migraine provided one milk sample before their dose, then additional milk samples at 1, 2, 4, 8, 12 and 24 hours after their 10 mg oral dose. The average peak milk level was 58.4 mcg/L (range 14.6 to 105.6 mcg/L) and occurred 2 hours after the dose in 4 women ad 4 hours after the dose in another. The average milk level was 9 mcg/L (range 2.6 to 14.8 mcg/L) and the average half-life in milk was 2.2 hours (range 1.6 to 3.1 hours). The average daily infant dosage of rizatriptan was 1.3 mcg/kg (range 0.4 to 2.2 mcg/kg) and the weight-adjusted infant dosage averaged 0.9% (range 0.5 to 1.4%) of the maternal dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A review of four European adverse reaction databases found 26 reported cases of painful, burning nipples, painful breasts, breast engorgement and/or painful milk ejection in women who took a triptan while nursing. Pain was sometimes intense and occasionally led to decreased milk production. Pain generally subsided with time as the drug was eliminated. The authors proposed that triptans may cause vasoconstriction of the arteries in the breast, nipples, and the arteries surrounding the alveoli and milk ducts, causing a painful sensation and a painful milk ejection reﬂex.[2]

### Alternate Drugs to Consider

Eletriptan, Sumatriptan, Zolmitriptan

### References

1 Amundsen S, Nordeng H, Fuskevåg OM, et al. Transfer of triptans into human breast milk and estimation of infant drug exposure through breastfeeding. Basic Clin Pharmacol Toxicol 2021;128:795-804.33730376
2 Conijn M, Maas V, van Tuyl M, et al. Breastfeeding-related adverse drug reactions of triptans: A descriptive analysis using four pharmacovigilance databases. Breastfeed Med 2024;19:645-51.38563407

## Substance Identification

### Substance Name

Rizatriptan

### CAS Registry Number

144034-80-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Serotonin Receptor Agonists

Serotonin 5-HT1 Receptor Agonists

Triptans

Vasoconstrictor Agents